# Primaquine

CASRN: 90-34-6

## Drug Levels and Effects

### Summary of Use during Lactation

Primaquine and its metabolite are poorly excreted into breastmilk of nursing mothers and undetectable in the serum of their breastfed infants. Breastfed infants beyond the neonatal period have shown no evidence of hemolysis. Neonates and infants with glucose-6-phosphate dehydrogenase (G6PD) deficiency have not been studied, but G6PD-deficient infants over 28 days of age appear to have a low risk of hemolysis from exposure in breastmilk.[1–3] Modeling suggests that nursing mothers can receive primaquine with little risk to their infants, even if the infants are G6PD deficient.[4]

United Kingdom malaria treatment guidelines recommend that primaquine be avoided in nursing mothers with malaria and that weekly chloroquine 500 mg be given until breastfeeding is completed.[5] However, these guidelines were developed before information on the excretion of primaquine into breastmilk and safety in breastfed infants was published. More recent information indicates that all mothers nursing infant over 28 days of age could safely receive primaquine.[1] The Centers for Disease Control and Prevention guidelines state that primaquine may be used in breastfeeding mothers and infants with normal G6PD levels.[6] Because the small amounts of primaquine transferred in breast milk are insufficient to provide adequate protection or treatment of malaria, infants who require chemoprophylaxis or therapy must receive the recommended dosages of primaquine.

### Drug Levels

Primaquine’s major metabolite is carboxyprimaquine, which has unknown activity against malaria. Primaquine’s half-life is about 6 hours and carboxyprimaquine’s half-life is 22 to 30 hours.

Maternal Levels. Twenty-one mothers with vivax malaria were given a dosage of primaquine 0.5 mg/kg daily for 14 days. Milk samples were taken on days 0 (first day of therapy), 3, 7, and 13 of therapy at various times after the dose. Peak breastmilk primaquine concentrations occurred about 1 hour after peak plasma concentrations (usually 3.4 to 3.9 hours after the dose) and averaged 44 mcg/L. Average peak breastmilk carboxyprimaquine concentrations 0f 7.2 mcg/L occurred 19 hours after the dose on day 0, and 12.1 mcg/L at hours 4 hours after the dose on day 13.[7] These data and infant blood levels of primaquine and its metabolite were incorporated into a population pharmacokinetic model. The model showed that primaquine and carboxyprimaquine weight-adjusted relative infant dosages ranged from 0.47% to 0.51% with maternal doses ranging from 0.25 mg/kg to 1 mg/kg daily. The authors concluded that even in infants with the most severe G6PD deficiency variants, it is highly unlikely that standard doses of primaquine (0.25 to 1 mg base/kg once daily given to the mother for 1 to 14 days) would cause clinically important hemolysis.[3]

A physiologically based pharmacokinetic model was constructed to simulate breastmilk and infant serum levels and compared to published milk level data. Results indicate that the relative infant dosage in infants would be less than 0.13%. the absolute infant dosage would be less than the dosage that might cause hemolysis in infants over 28 days of age with G-6-PD deficiency.[2]

A physiologically based pharmacokinetic model has been developed that adequately predicts primaquine excretion into breastmilk.[8]

Infant Levels. Twenty-one mothers with vivax malaria were given a dosage of primaquine 0.5 mg/kg daily for 14 days. Capillary blood samples were taken from the infants on days 0 (first day of therapy), 3, 7, and 13 of therapy at various times after the dose and after breastfeeding. All infant blood samples had unmeasurable amounts of primaquine (<1.14 mcg/L) and only 1 infant blood sample contained a measurable amount of carboxyprimaquine of 2.59 mcg/L on day 7 hour 0. Based on milk concentrations, the authors calculated median total cumulative primaquine dose expected to be ingested by the infant over the 14-day course based on measured breast milk concentrations to be approximately 0.042 mg/kg, corresponding to 2.98 mcg/kg daily (0.6% of a hypothetical infant daily dose of 0.5 mg/kg). The highest cumulative infant dose was estimated at 0.127 mg/kg, or 9.07 mcg/kg daily, which is 1.8% of a hypothetical infant daily dose of 0.5 mg/kg.[7] These data and infant blood levels of primaquine and its metabolite were incorporated into a population pharmacokinetic model, which indicated that infant serum levels would be undetectable (<1.8 mcg/L for primaquine and <7.8 mcg/L for carboxyprimaquine).[3]

### Effects in Breastfed Infants

Twenty-one mothers with vivax malaria were given a dosage of primaquine 0.5 mg/kg daily for 14 days while breastfeeding their infants who were at least 28 days old. No alterations in hematocrit, Heinz body counts, serum bilirubin, oxygen saturation, or methemoglobinemia were seen in any of the infants.[7]

A woman with vivax malaria who was 5 months postpartum was given a dose of primaquine of 0.52 mg/kg daily for 7 days, then 0.46 mg/kg daily for 7 days after rechecking the patient’s weight. She was found to be heterozygous for glucose-6-phosphate dehydrogenase (G6PD) deficiency and experienced some hemolysis and anemia. Her female infant was being breastfed (extent not stated) during treatment and was found to be heterozygous for the G6PD Mahidol variant, but had no apparent hemolysis. The child’s vaccination schedule was completed, and the 6-month motor milestones were normal.[9]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Atovaquone and Proguanil, Chloroquine, Doxycycline, Mefloquine

### References

1 Watson J, Taylor WRJ, Bancone G, . Implications of current therapeutic restrictions for primaquine and tafenoquine in the radical cure of vivax malaria. PLoS Negl Trop Dis 2018;12:e0006440.29677199
2 Pan X, Abduljalil K, Almond LM, . Supplementing clinical lactation studies with PBPK modeling to inform drug therapy in lactating mothers: Prediction of primaquine exposure as a case example. CPT Pharmacometrics Syst Pharmacol 2024;13:386–95.38084656
3 Wattanakul T, Gilder ME, McGready R, . Population pharmacokinetic modelling of primaquine exposures in lactating women and breastfed infants. Nat Commun 2024;15:3851.38719803
4 Abla N, Marrast AC, Jambert E, . Addressing health equity for breastfeeding women: Primaquine for Plasmodium vivax radical cure. Malar J 2024;23:287.39334094
5 Lalloo DG, Shingadia D, Bell DJ, . UK Malaria Treatment Guidelines 2016. J Infect 2016;72:635–49.26880088
6 Malaria. In: Centers for Disease Control and Prevention. CDC Yellow Book 2026: Health Information for International Travel. 2026. https://www.cdc.gov/yellow-book/hcp/travel-associated-infections-diseases/malaria.html#treatment
7 Gilder ME, Hanpithakphong W, Hoglund RM, . Primaquine pharmacokinetics in lactating women and breastfed infant exposures. Clin Infect Dis 2018;67:1000–7.29590311
8 Almond LM, Abduljalil K, Pansari A, . PBPK-led assessment of antimalarial drug concentrations in breastmilk: A strategy for optimal use of prediction methods to guide decision making in an understudied population. CPT Pharmacometrics Syst Pharmacol 2025;14:738–50.39930940
9 Brummaier T, Gilder ME, Gornsawun G, . Vivax malaria in pregnancy and lactation: A long way to health equity. Malar J 2020;19:40.31969155

## Substance Identification

### Substance Name

Primaquine

### CAS Registry Number

90-34-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents